# Osilodrostat

CASRN: 928134-65-0

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of osilodrostat during breastfeeding. Because of the potential for serious adverse reactions, such as adrenal insufficiency, in the breastfed infant, breastfeeding is not recommended during treatment with osilodrostat and should be avoided until 1 week after the final dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Osilodrostat

### CAS Registry Number

928134-65-0

### Drug Class

Breast Feeding

Lactation

Enzyme Inhibitors